# Bictegravir

CASRN: 1611493-60-7

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal bictegravir 50 mg once daily produce low levels in milk and infant serum. Achieving and maintaining viral suppression with antiretroviral therapy decreases breastfeeding transmission risk to less than 1%, but not zero. Individuals with HIV who are on antiretroviral therapy with a sustained undetectable viral load and who choose to breastfeed should be supported in this decision. If a viral load is not suppressed, banked pasteurized donor milk or formula is recommended.[1,2]

### Drug Levels

Maternal Levels. A mother taking bictegravir 50 mg once daily provided 3 milk samples at a median of 8.5 hours after a dose. The median drug concentration in milk was 57 mcg/L, which resulted in an estimated infant dosage of 10 mcg/kg daily.[3]

Twelve healthy lactating volunteers took a single 50 mg dose of bictegravir in a combination product that also contained emtricitabine 200 mg and tenofovir alafenamide 25 mg (Biktarvy). Milk samples were taken before the dose and 2, 4, 6, 12 and 24 hours after the dose. The mean peak milk concentration was 0.03 mg/L occurring at a mean of 3.13 hours after the dose. The estimated median daily infant dosage was 0.0378 mg/kg and the RID was 0.68%.[4]

Infant Levels. An infant was breastfed by a mother taking bictegravir 50 mg once daily, although the extent of breastfeeding was not sated. The infant’s serum concentrations taken 19 hours after maternal drug intake at 1 month of age was 103 mcg/L.[3]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Gynecomastia has been reported among men receiving highly active antiretroviral therapy. Gynecomastia is unilateral initially, but progresses to bilateral in about half of cases. No alterations in serum prolactin were noted and spontaneous resolution usually occurred within one year, even with continuation of the regimen.[5-7] Some case reports and in vitro studies have suggested that protease inhibitors might cause hyperprolactinemia and galactorrhea in some male patients,[8,9] although this has been disputed.[10] The relevance of these findings to nursing mothers is not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Raltegravir

### References

1 Department of Health and Human Services. Recommendations for the use of antiretroviral drugs during pregnancy and interventions to reduce perinatal HIV transmission in the United States. 2024 https://clinicalinfo.hiv.gov/sites/default/files/guidelines/documents/perinatal-hiv/guidelines-perinatal.pdf
2 World Health Organization. Consolidated guidelines on HIV prevention, testing, treatment, service delivery and monitoring: Recommendations for a public health approach. 2021 https://www.who.int/publications/i/item/9789240031593
3 Aebi-Popp K, Kahlert CR, Crisinel PA, et al. Transfer of antiretroviral drugs into breastmilk: A prospective study from the Swiss Mother and Child HIV Cohort Study. J Antimicrob Chemother 2022;77:3436–42.36177836
4 van der Wekken-Pas LC, van Leeuwen E, van Ewijk-Beneken Kolmer EWJ, et al. Bictegravir concentrations in breastmilk of healthy, lactating women without HIV. J Antimicrob Chemother 2026;81:dkag022.41628196
5 García-Benayas T, Blanco F, Martin-Carbonero L, et al. Gynecomastia in HIV-infected patients receiving antiretroviral therapy. AIDS Res Hum Retroviruses 2003;19:739–41.14585204
6 Pantanowitz L, Evans D, Gross PD, et al. HIV-related gynecomastia. Breast J 2003;9:131–2.12603389
7 Evans DL, Pantanowitz L, Dezube BJ, et al. Breast enlargement in 13 men who were seropositive for human immunodeficiency virus. Clin Infect Dis 2002;35:1113–9.12384846
8 Hutchinson J, Murphy M, Harries R, et al. Galactorrhoea and hyperprolactinaemia associated with protease-inhibitors. Lancet 2000;356:1003–4.11041407
9 Orlando G, Brunetti L, Vacca M. Ritonavir and saquinavir directly stimulate anterior pituitary prolactin secretion, in vitro. Int J Immunopathol Pharmacol 2002;15:65–8.12593790
10 Montero A, Bottasso OA, Luraghi MR, et al. Galactorrhoea, hyperprolactinaemia, and protease inhibitors. Lancet 2001;357:473–5.11273087

## Substance Identification

### Substance Name

Bictegravir

### CAS Registry Number

1611493-60-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

HIV Integrase Inhibitors